# Cisapride

CASRN: 81098-60-4

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Cisapride was removed from the market in the United States by the U.S. Food and Drug Administration because of cardiac toxicity. Because of the low levels of cisapride in breastmilk, its use is acceptable in nursing mothers if it is required.

### Drug Levels

Maternal Levels. Ten women who averaged 1.2 days postpartum were given cisapride 20 mg orally every 8 hours for 4 days. Cisapride milk samples obtained before and 1 hour after the midday dose on day 4 were 4.8 mcg/L and 6.2 mcg/L, respectively.[1] The peak concentration corresponds to a maximum dose of 0.93 mcg/kg daily which is less that the 0.6 to 0.8 mg/kg daily infant dosage and about 0.1% of the maternal weight-adjusted dosage.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Metoclopramide

### References

1. Hofmeyr GJ, Sonnendecker EWW. Secretion of the gastrokinetic agent cisapride in human milk. Eur J Clin Pharmacol. 1986;30:735-6.3770067

## Substance Identification

### Substance Name

Cisapride

### CAS Registry Number

81098-60-4

### Drug Class

- Breast Feeding
- Lactation
- Gastrointestinal Agents
- Serotonin Agonists